# Reserpine

CASRN: 50-55-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of reserpine during breastfeeding and it might adversely affect the breastfed infant, an alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Although not well documented, reserpine is said to cause nasal stuffiness and increased tracheobronchial secretions in breastfed infants.[1]

### Effects on Lactation and Breastmilk

Reserpine has reportedly caused galactorrhea and has been used to increase breastmilk production, although it is obsolete for this use.[2-4]

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Methyldopa, Nifedipine, Propranolol

### References

1 Knowles JA. Drugs in milk. Pediatr Currents Ross Laboratories 1972;21:28-32
2 Vaidya RA, Vaidya AB, Van Woert MH, et al. Galactorrhea and Parkinson-like syndrome: An adverse effect of alpha-methyldopa. Metabolism 1970;19:1068-70 4923681
3 Mazhbits IA. Use of reserpine as a lactogenic substance. Akush Ginekol (Mosk) 1970;46:70-2 5433043
4 Somlyo AP, Wayde JD. Abnormal lactation. Report of a case induced by reserpine and a brief review of the subject. J Mt Sinai Hosp N Y 1960;27:5-9 13832752

## Substance Identification

### Substance Name

Reserpine

### CAS Registry Number

50-55-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents